# Amantadine

CASRN: 768-94-5

## Drug Levels and Effects

### Summary of Use during Lactation

It is probably best to avoid amantadine during breastfeeding because of its potential negative effect on lactation. An alternative medication is recommended.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Amantadine is a dopamine agonist. Clinical studies using amantadine dosages of 100 mg 2 or 3 times daily have demonstrated a decrease in serum prolactin and decreased galactorrhea in patients taking dopaminergic neuroleptic drugs such as phenothiazines, haloperidol and loxapine.[1,2] No studies have been reported on the effects of amantadine on the milk supply in nursing mothers. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Influenza) Oseltamivir, Zanamivir

### References

1 Correa N, Opler LA, Kay SR, . Amantadine in the treatment of neuroendocrine side effects of neuroleptics. J Clin Psychopharmacol 1987;7:91–5.2884239
2 Siever LJ. The effect of amantadine on prolactin levels and galactorrhea on neuroleptic-treated patients. J Clin Psychopharmacol 1981;1:2–7.6117579

## Substance Identification

### Substance Name

Amantadine

### CAS Registry Number

768-94-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparkinson Agents

Antiviral Agents

Dopamine Agents